# Beclomethasone

CASRN: 4419-39-0

## Drug Levels and Effects

### Summary of Use during Lactation

Although not measured, the amounts of inhaled corticosteroids absorbed into the maternal bloodstream and excreted into breastmilk are probably too small to affect a breastfed infant. Expert opinion considers inhaled, nasal and oral corticosteroids acceptable to use during breastfeeding.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

None reported with any corticosteroid. Three infants were breastfed for 6 months during maternal treatment with beclomethasone dipropionate by inhaler.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Budesonide

### References

1 National Heart, Lung, and Blood, Institute, National Asthma, Education, and, Prevention, Program, Asthma, and, Pregnancy, Working, Group. NAEPP expert panel report. Managing asthma during pregnancy: recommendations for pharmacologic treatment-2004 update. J Allergy Clin Immunol 2005;115:34-46.15637545
2 Middleton PG, Gade EJ, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208.31699837
3 Brown HM, Storey G. Treatment of allergy of the respiratory tract with beclomethasone dipropionate steroid aerosol. Postgrad Med J 1975;51 (Suppl 4):59-64.1105520

## Substance Identification

### Substance Name

Beclomethasone

### CAS Registry Number

4491-39-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Allergic Agents

Anti-Asthmatic Agents

Corticosteroids, Inhaled

Glucocorticoids

Anti-Inflammatory Agents